# Penicillin G

CASRN: 61-33-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that penicillin G produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Penicillin G is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Ten women were given 100,000 units of penicillin G intramuscularly as a single dose or every 2 hours for 6 hours. Milk levels at 1 to 2 hours after the dose ranged from unmeasurable to 30 units/L after a single dose and an average of 50 units/L after multiple doses.[1]

A single dose of penicillin G was given intramuscularly to 10 women. With doses of 200,000 units in 4 women, milk levels were about 60 units/L and were relatively constant for 6 hours after the dose. With doses of 500,000 units in 4 women, milk levels of penicillin reached 240 units/L at 2 to 4 hours after the dose. With 600,000 units in 2 women, peak levels of 240 to 360 units/L occurred at 4 hours after the dose.[2]

After 2 doses of 2 million units of penicillin G intramuscularly in 15 women, peak milk levels were 120 units/L and trough levels were 10 units/L. After 2 doses of 4 million units of penicillin G intramuscularly in 5 women, peak milk levels were 220 units/L and trough levels were 30 units/L. With both doses, peak levels occurred 3 to 6 hours after the dose.[3]

After a dose of 360 mg (about 550,000 units) of penicillin G intramuscularly in 2 women, milk levels averaged 0.35 mg/L (530 units/L) at 1 hour, 0.2 mg/L (300 units/L) at 2 hours, and 0.1 mg/L (150 units/L) at 4 hours after the dose. Only a trace was detectable at 6 hours after the dose.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A breastfed 1-month-old infant with congenital syphilis developed a Herxheimer reaction 6 hours after its mother received 2.4 million units of benzathine penicillin G intramuscularly. However, the baby had also received 10 units of penicillin G at about the same time as the mother's injection. The reaction was possibly caused by penicillin in breastmilk.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Greene HJ, Burkhart B, Hobby GL. Excretion of penicillin in human milk following parturition. Am J Obstet Gynecol 1946;51:732-3 21025164
2 Rozansky R, Brzezinsky A. The excretion of penicillin in human milk. J Lab Clin Med 1949;34:497-500 18116312
3 Borderon E, Soutoul JH, Borderon JC, et al. Excretion of antibiotics in human milk. Med Mal Infect 1975;5:373-6
4 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60 6743732
5 Rollier R, Rollier M, Bellouchi M. Herxheimer's reaction in maternal milk in early congenital syphilis. Bull Soc Fr Dermatol Syphiligr 1967;74:178-80 6070262

## Substance Identification

### Substance Name

Penicillin G

### CAS Registry Number

61-33-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins